# Moexipril

CASRN: 103775-10-6

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of moexipril during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Candesartan, Benazepril, Captopril, Enalapril, Lisinopril, Quinapril, Valsartan

## Substance Identification

### Substance Name

Moexipril

### CAS Registry Number

103775-10-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Angiotensin-Converting Enzyme Inhibitors

ACE Inhibitors